# Dimethyl Fumarate

CASRN: 624-49-7; 1577222-14-0

## Drug Levels and Effects

### Summary of Use during Lactation

The active form of both dimethyl fumarate and diroximel fumarate is monomethyl fumarate. Amounts of monomethyl fumarate in breastmilk appear to be low and would not be expected to cause any adverse effects in breastfed infants. Clinical data in over 20 infants indicates that it is acceptable to use during breastfeeding, at least after one month of age[1,2] Breastfed infants should be monitored for adequate weight gain and developmental milestones, especially in younger, exclusively breastfed infants. Some authors also recommend monitoring breastfed infants for flushing, vomiting and diarrhea.[3,4]

### Drug Levels

Dimethyl fumarate is not found in the plasma because it is rapidly converted to the active drug, monomethyl fumarate, which has a half-life of about 1 hour.

Maternal Levels. Two nursing mothers with relapsing-remitting multiple sclerosis began oral dimethyl fumarate 240 mg twice daily after discontinuing breastfeeding. They continued pumping milk and on day 8 of therapy, they each provided milk samples at 1, 2, 4, 8 and 12 hours after a dose. Peak monomethyl fumarate milk levels were 3.7 mcg/L in one mother and 11.2 mcg/L in the other and occurred at about 2 hours after the dose. Average milk levels were 2.7 mcg/L and 7.5 mcg/L, respectively. These values indicate that the infants would receive daily dosages of about 0.8 mcg/kg and 1.13 mcg/kg, respectively, or weight-adjusted relative infant dosages of 0.007% and 0.019% of the maternal dosage.[4]

A woman with multiple sclerosis who was 3 months postpartum began dimethyl fumarate 120 mg (Polpharma SA Pharmaceutical works, Starogard Gdański, Poland) orally twice daily after weaning her infant. Four milk samples were collected over a 24-hour period 6 days after starting therapy. The concentration of monomethyl fumarate ranged from 83.5 mcg/L just after a dose to undetectable (<5.5 mcg/L) at 2 hours before the next dose. The authors estimated a daily dose of 5.76 mcg/kg with a daily milk intake of 150 mL/kg, which represents a relative infant dose of 0.16%.[5]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Twenty-six women taking dimethyl fumarate for relapsing-remitting multiple sclerosis were followed during 29 pregnancies from 2015 to 2020. Dimethyl fumarate was administered through week 24 of pregnancy and resumed 1 month after delivery. Twenty-two of 26 mothers breastfed (extent not stated) for 4 to 7 months. Infants were monitored up to the third year of life for infections and developmental disorders. All children were the 70th and 95th percentile for height and weight. The authors concluded that continuing dimethyl fumarate while breastfeeding is safe,[1] although infants were not exposed during the first month of life.

One group reported two mothers with multiple sclerosis who resumed taking dimethyl fumarate 1 week after delivery while partially breastfeeding their infants. One was taking 240 mg daily and withheld breastfeeding for 4 hours after each dose. The other was taking 480 mg daily with mixed feeding continuing for 15 months. The latter patient became pregnant again and once again used mixed feeding while taking dimethyl fumarate. All 3 infants developed normally and had no serious infections.[6]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Multiple Sclerosis) Glatiramer, Immune Globulin, Interferon Beta

### References

1 Borriello G, Ianniello A. Efficacy, safety and tolerability of dimethylfumarate during pregnancy and breastfeeding. Mult Scler Relat Disord 2022;67:103949. doi:10.1016/j.msard.2022.103951
2 MacIsaac S, Krysko KM. Reproductive health in multiple sclerosis patients: overcoming challenges and improving patient care. Neurodegener Dis Manag 2026:1-3.
3 Almas S, Vance J, Baker T, . Management of multiple sclerosis in the breastfeeding mother. Mult Scler Int 2016;2016:6527458.26966579
4 Ciplea AI, Datta P, Rewers-Felkins K, . Dimethyl fumarate transfer into human milk. Ther Adv Neurol Disord 2020;13:x.
5 Van Neste M, Nauwelaerts N, Ceulemans M, . Very low monomethyl fumarate exposure via human milk: A case report—a contribution from the ConcePTION project. Front Public Health 2024;12:1393752. doi:10.3389/fpubh.2024.1393752 39015385
6 Saito S, Ikeguchi R, Kitagawa K, . Clinical experience with dimethyl fumarate and natalizumab in pregnant women with multiple sclerosis: A four-patient case series. Case Rep Neurol Med 2024;2024:7808140.39044765

## Substance Identification

### Substance Name

Dimethyl Fumarate

### CAS Registry Number

624-49-7; 1577222-14-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Dermatologic Agents

Immunosuppressive Agents

Radiation-Sensitizing Agents